# Givinostat

CASRN: 497833-27-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of givinostat during breastfeeding. Because it is 96% bound to human plasma proteins, amounts in milk are likely to be very low. If a mother requires givinostat, it is not a reason to discontinue breastfeeding. Until more data become available, givinostat should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Monitor the breastfed infant for diarrhea, vomiting, bruising, excessive bleeding from cuts, and blood in the stool.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Givinostat

### CAS Registry Number

497833-27-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Histone Deacetylase Inhibitors